# Acetylcholine

CASRN: 51-84-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of acetylcholine ophthalmic drops during breastfeeding. Because of its short half-life, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. In animals, cholinergic drugs increase oxytocin release, and have variable effects on serum prolactin.[1,2] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Clarke G, Fall CH, Lincoln DW, et al. (1978). Effects of cholinoceptor antagonists on the suckling-induced and experimentally evoked release of oxytocin. Br J Pharmacol.
2 Müller EE, Locatelli V, Cella S, et al. (1983). Prolactin-lowering and -releasing drugs: Mechanisms of action and therapeutic applications. Drugs.

## Substance Identification

### Substance Name

Acetylcholine

### CAS Registry Number

51-84-3

### Drug Class

Breast Feeding

Lactation

Miotics

Muscarinic Agonists

Parasympathomimetics